# Butoconazole

CASRN: 64872-76-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Vaginal butoconazole has not been studied during breastfeeding. About 5.5% of a vaginal dose is absorbed and its plasma half-life is 21 to 24 hours. Because there is no published experience with butoconazole during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Miconazole

## Substance Identification

### Substance Name

Butoconazole

### CAS Registry Number

64872-76-0

### Drug Class

- Breast Feeding
- Lactation
- Anti-Infective Agents
- Antifungal Agents
- Dermatologic Agents